# Ipilimumab

CASRN: 477202-00-9

## Drug Levels and Effects

### Summary of Use during Lactation

The amount of ipilimumab in breastmilk appears to be very low after a single dose, but it may increase with subsequent doses during a treatment cycle. It is likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[1] Until more data become available, ipilimumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during ipilimumab therapy and for 3 months after the last dose.

### Drug Levels

Maternal Levels. A woman with recurrent malignant melanoma was treated with ipilimumab 3 mg/kg intravenously over 90 minutes once every 3 weeks for 4 doses, beginning soon after delivery. Breast milk and serum samples were collected before she began therapy and at various times over the first 2 dosage intervals. A total of 26 daily breastmilk samples were obtained. Breastmilk levels of ipilimumab were at their highest of about 90 mcg/L at 10 days after the first infusion, and were lowest at 41 mcg/L at the time of the second infusion, 19 days after the first infusion. A peak milk level of 147 mcg/L was reached 4 days after the second infusion. It was apparent that accumulation took place after the second dose. The authors estimated that a fully breastfed infant would ingest a total of 4.5 mg of ipilimumab over a 4 month treatment cycle.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with recurrent malignant melanoma was treated with ipilimumab 3 mg/kg intravenously over 90 minutes once every 3 weeks for 4 doses, beginning soon after delivery. She began breastfeeding 21 days after her 12 weeks of therapy was completed. At 30 weeks after treatment she was well, but no mention was made of the duration of breastfeeding or the health of her infant.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
2 Ross E, Robinson SE, Amato C, . Therapeutic monoclonal antibodies in human breast milk: A case study. Melanoma Res 2014;24:177-80.24476799

## Substance Identification

### Substance Name

Ipilimumab

### CAS Registry Number

477202-00-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents

Biological Response Modifiers

Immunologic Adjuvants

Immune Checkpoint Inhibitors